# Imatinib

CASRN: 152459-95-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of imatinib up to 400 mg daily produce low levels of the drug and its active metabolite in milk. Although a few breastfed infants apparently experienced no adverse effects during maternal use of imatinib, no long-term data are available. Until more data are available, imatinib should be used only with careful monitoring during breastfeeding. National Comprehensive Cancer Network guidelines, the manufacturer and some authors recommend that breastfeeding be discontinued during imatinib therapy and for 1 month after therapy.[1-3]

### Drug Levels

Imatinib is metabolized to an equally active metabolite, CGP 74588. The half-lives of the drug and its active metabolite are 18 and 40 hours, respectively, so accumulation might occur in the infant.

Maternal Levels. A woman receiving oral imatinib 400 mg daily for chronic myeloid leukemia breastfed her infant. During week 4 postpartum, serum and milk levels of imatinib and CGP 74588 were measured before and at several times during the 9 hours after the dose. The highest concentrations of imatinib and its metabolite were at 2 and 4 hours after the dose. Peak concentrations of imatinib ranged between 1.1 and 1.4 mg/L and were 0.8 mg/L for the metabolite. The concentrations of both were 25 to 50% lower 9 hours after the dose. Milk and serum levels were also measured during the second month of breastfeeding with similar results (details not reported).[4] Using these data, the estimated maximum dosage of the drug and metabolite that a fully breastfed infant would receive is 0.3 mg/kg daily or 4.5% of the maternal weight-adjusted dosage.

A woman who was 7 days postpartum and had been taking imatinib 400 mg daily since the middle of her pregnancy had a single milk sample analyzed for the drug and its metabolite. Milk concentration 15 hours after a dose was 596 mcg/L for imatinib and 1513 mcg/L for the metabolite. The authors estimated that a fully breastfed infant would receive between 1.2 and 2 mg of the drug and metabolite daily with this maternal dose.[5]

A woman who took imatinib 400 mg daily during pregnancy and postpartum delivered a normal infant, but did not breastfeed. Breastmilk imatinib concentrations were measured on the 7th, 14th, 15th and 16th days postpartum at times ranging from 10 to 16 hours after the previous dose. Breastmilk concentrations ranged between 1.4 and 2.6 mg/L.[6]

A woman with chronic myeloid leukemia was begun on imatinib 400 mg daily immediately after delivery. She did not breastfeed, but 5 breastmilk samples were obtained over the 7 days after the first dose, on days 1, 2, 3 and 7 postpartum, apparently 3 hours after the daily doses (exact times not stated). Imatinib milk levels were about half of maternal plasma levels and ranged from 151 to 1153 mcg/L. Milk levels of the metabolite, N-desmethylimatinib were about 3 times those in maternal plasma and ranged from 409 to 1052 mcg/L.[7]

A woman received imatinib 400 mg daily beginning in week 30 of pregnancy. Colostrum and milk samples obtained during the first 5 days postpartum contained an average of 0.233 mg/L of imatinib and 0.529 mg/L of n-desmethylimatinib, the active metabolite. The authors estimated that an exclusively breastfed infant would ingest a mean of 0.12 mg/kg daily of the active drug (imatinib plus metabolite).[8] This would equate to approximately 1.8% of the weight-adjusted maternal dosage.

A woman with chronic myeloid leukemia began treatment with imatinib 400 mg daily in week 28 of pregnancy. The drug was discontinued 72 hours prior to the scheduled induction of labor. A breastmilk was taken postpartum at 99 hours after the last dose. The concentration of imatinib in breastmilk was 18.9 mcg/L and the concentration of n-desmethylimatinib was 658 mcg/L, both using control breastmilk as a standard.[2]

Two women with Ph+ chronic myelocytic leukemia were taking imatinib before pregnancy, but stopped until breastfeeding ceased. Each received one dose of imatinib orally and took milk samples at 1, 2, 4, 6, 8, 12 and 24 hours after the dose. One patient received imatinib 400 mg and had a peak milk concentration of 1.4 mg/L at 4 hours after the dose and 0.42 mg/L at 8 hours after the dose. The other patient received imatinib 400 mg on day 1 and imatinib at 600 mg on day 2 of milk collection. She had a peak milk concentration of 0.42 mg/L at 8 hours after the 400 mg dose and a peak concentration of 1.4 mg/L at 6 hours after the 600 mg dose.[9]

A pregnant woman with Philadelphia chromosome-positive chronic myelogenous leukemia was started on imatinib 400 mg daily during pregnancy. After delivery, a milk sample was taken just prior to the mother’s dose on day 5 postpartum. A concentration of 663 mcg/L of imatinib was found in breastmilk, which equated to a weight-adjusted dose of 1.4% of the maternal dose.[10]

Infant Levels. A pregnant woman with Philadelphia chromosome-positive chronic myelogenous leukemia was started on imatinib 400 mg daily during pregnancy. An infant blood sample was taken just prior to the mother’s dose on day 5 postpartum. The infant serum concentration was 27 mcg/L.[10]

### Effects in Breastfed Infants

A woman receiving oral imatinib 400 mg daily for chronic myeloid leukemia breastfed her infant. No adverse effects were noted in the infant during the first 2 months of nursing.[4]

One woman with chronic myelogenous leukemia received imatinib 400 mg daily throughout pregnancy and during breastfeeding (extent not stated) for nearly 6 months postpartum. Her infant reportedly grew and developed normally.[11]

A woman with chronic myeloid leukemia received imatinib 400 mg daily starting at week 8 of pregnancy and continuing throughout 8 months of breastfeeding (extent not stated). The infant was healthy, but an atrial septal defect was repaired at 30 months of age. It was thought to be unrelated to imatinib therapy.[12]

A pregnant woman with Philadelphia chromosome-positive chronic myelogenous leukemia was started on imatinib 400 mg daily during pregnancy. After delivery, her preterm infant was fed colostrum until the middle of the fifth day postpartum when exclusive formula feeding was instituted. The infant was treated for apnea of prematurity and discharged on day 25 of life. No adverse effects on growth or development were noted during the first year of life.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Burwick RM, Kuo K, Brewer D, et al. Maternal, fetal, and neonatal imatinib levels with treatment of chronic myeloid leukemia in pregnancy. Obstet Gynecol 2017;129:831-4.28383372
3 Deininger MW, Shah NP, Altman JK, et al. Chronic myeloid leukemia, Version 2.2021, NCCN clinical practice guidelines in oncology. J Natl Compr Canc Netw 2020;18:1385-415.33022644
4 Gambacorti-Passerini CB, Tornaghi L, Marangon E, et al. Imatinib concentrations in human milk. Blood 2007;109:1790.17284536
5 Russell MA, Carpenter MW, Akhtar MS, et al. Imatinib mesylate and metabolite concentrations in maternal blood, umbilical cord blood, placenta and breast milk. J Perinatol 2007;27:241-3.17377606
6 Ali R, Ozkalemkas F, Kimya Y, et al. Imatinib use during pregnancy and breast feeding: A case report and review of the literature. Arch Gynecol Obstet 2009;280:169-75.19083009
7 Kronenberger R, Schleyer E, Bornhauser M, et al. Imatinib in breast milk. Ann Hematol 2009;88:1265-6.19462170
8 Gouraud A, Vial T, Ianotto JC, et al. Imatinib concentration in breast milk: A case report. Fundam Clin Pharmacol 2013;27 (Suppl 1):68. doi:10.1111/fcp.12026
9 Chelysheva E, Aleshin S, Polushkina E, et al. Breastfeeding in patients with chronic myeloid leukaemia: Case series with measurements of drug concentrations in maternal milk and literature review. Mediterr J Hematol Infect Dis 2018;10:e2018027.29755704
10 Terao R, Nii M, Asai H, et al. Breastfeeding in a patient with chronic myeloid leukemia during tyrosine kinase inhibitor therapy. J Oncol Pharm Pract 2020;27:756-60.32787559
11 Jiang Q, Jiang B, Chen SS, et al. [Pregnancy outcome among patients with chronic myelogenous leukemia treated with tyrosine kinase inhibitors]. Zhonghua Xue Ye Xue Za Zhi 2012;33:6-9.22575184
12 Alizadeh H, Jaafar H, Kajtar B. Outcome of 3 pregnancies in a patient with chronic myeloid leukemia who received 3 types of tyrosine kinase inhibitors each in different pregnancy: Follow-up of the case with a review of published reports. Ann Saudi Med 2015;35:468-71.26657232

## Substance Identification

### Substance Name

Imatinib

### CAS Registry Number

152459-95-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Tyrosine Kinase Inhibitors